# Levetiracetam

CASRN: 102767-28-2

## Drug Levels and Effects

### Summary of Use during Lactation

Levels of levetiracetam in milk can be high in some women and can occasionally cause sedation and other adverse effects in their breastfed infants. If levetiracetam is required by the mother, it is not necessarily a reason to discontinue breastfeeding. However, the infant should be monitored for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsants. Maternal serum level monitoring and dosage adjustment is advisable in the early postpartum period if the drug was taken throughout pregnancy and breastfeeding.[1] Some evidence suggests that levetiracetam might reduce the maternal breastmilk supply in some women.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, many women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A woman who was taking phenytoin, valproic acid and an unspecified dosage of levetiracetam had a milk levetiracetam level of 16.9 mg/L 3 hours after a dose, which was 3.1 times her simultaneous serum level.[2]

Breastmilk levels in 12 mothers who were monitored at 4 days and 2 to 3 months postpartum were "significantly lower" than maternal blood levels. Further details were not published in the abstract.[3]

Seven women taking an average of 2430 mg daily (range 1500 to 3500 mg daily) of levetiracetam plus various other anticonvulsants for epilepsy at the time of delivery had foremilk levels measured 3 to 5 days postpartum. Average milk levels were 12.5 mg/L (range 4.8 to 26 mg/L). Milk levels were again measured in 5 of the women plus another woman at one or more of the following times: 2, 4, 6 to 8 weeks and 4 or 10 months postpartum. Specific milk levels were not reported at those times, but the milk to plasma ratio was very similar at those times to the values at 3 to 5 days postpartum.[4]

Eleven mothers who were 4 to 23 days postpartum and taking levetiracetam provided milk samples before nursing. Three women taking 100 mg daily had an average milk levetiracetam concentration of 8.68 mg/L (range 5.79 to 10.55 mg/L); 2 women taking 2000 mg daily had milk levels of 11.7 and 35.7 mg/L; 4 women taking 2500 mg daily had an average milk levetiracetam concentration of 13.95 mg/L (range 10 to 20.4 mg/L); and 2 women taking 3000 mg daily had milk concentrations of 17.4 and 29.1 mg/L. The authors estimated that a fully breastfed infant would receive 7.9% of the maternal weight-adjusted dosage.[5]

A pregnant woman was treated with levetiracetam 1000 mg and lacosamide 100 mg twice daily as well as enoxaparin and labetalol for the rest of her pregnancy and postpartum. Levetiracetam was undetectable (<3 mg/L) in a milk sample on day 5 postpartum (exact time not specified).[6]

Fifty-four women taking levetiracetam during pregnancy and postpartum had measurements of levetiracetam in colostrum taken on day 2 to 4 postpartum for routine monitoring. Colostrum levetiracetam levels ranged from 1.7 to 27.3 mg/L. Another 8 mothers had milk samples taken between day 7 and 31 (median 12 days) postpartum, mostly in the morning before their first dose. Their milk levels ranged from 2.8 to 21.6 mg/L.[7] The results of this study have been used to create a physiologically based pharmacokinetic model of levetiracetam in newborns that included umbilical cord concentrations from transplacental drug passage.[8]

Twenty women taking immediate-release levetiracetam collected steady-state milk samples before and 1, 3, 6, 9 and 12 hours after a dose. Average peak milk levels of 55 mg/L (range 32 to 76 mg/L) occurred at a mean of 1 hour (range 1 to 3 hours) after the dose. The average milk concentration was 36 mg/L and the trough breastmilk levetiracetam concentrations averaged 24.4 mg/L (range 8.6 to 42.3 mg/L). The infant daily dosage of levetiracetam was estimated to be 5.39 mg/kg daily in the fully breastfed infants and 2.7 mg/kg daily for the partially breastfed infants, which represents 12.8% and 6.4% of the maximum therapeutic daily dose of levetiracetam for 1- to 6 month-old infants. The relative weight-adjusted dosages were 13.8% and 6.9% of maternal dosage in the fully and partially breastfed infants, respectively.[9]

Infant Levels. An infant (aged approximately 1 to 2 weeks) of a mother taking phenytoin, valproic acid and levetiracetam (dosage unspecified) had a serum levetiracetam level of 1 mg/L 96 hours after the mother discontinued breastfeeding.[2]

Seven breastfed infants whose mothers were taking an average dosage of 2430 mg daily (range 1500 to 3500 mg daily) of levetiracetam plus various other anticonvulsants during pregnancy and lactation had serum levetiracetam measured before the mother's morning dose at 3 to 5 days of age. In 6 infants, levetiracetam was undetectable (<1.7 mg/L), although one of them had a serum level of 13 mg/L at the age of 1 day. A seventh infant who was fully breastfed had a serum level of 2.5 mg/L at 3 to 5 days of age. This infant and had serum levels ranging from 2.5 to 2.9 mg/L during the first 8 weeks of life and an undetectable serum level at 4 months of age.[4]

Ten infants who were 4 to 23 days old were breastfed by mothers taking levetiracetam in dosages of 1000 to 3000 mg daily. Infant plasma levels were obtained 30 to 120 minutes after nursing and before their mother's morning dose (10 to 15 hours after the last evening dose), except for one infant whose plasma was sampled before nursing. The average levetiracetam plasma concentration was 1.9 mg/L (range 0.7 to 3.4 mg/L). The infants' plasma levels averaged 13.5% of the maternal plasma concentration taken before their morning dose. The authors found that 13 newborns' levetiracetam elimination half-life averaged 18 hours, which is 2 to 3 times that of adults.[5]

The 10-day-old breastfed (extent not stated) infant of a mother who was taking levetiracetam 3000 mg daily had a serum concentration of 2.1 mg/L, which was less than half of the low end of the therapeutic range. Timing of the sample was not stated.[10]

In a multicenter study of nursing mother-infant pairs, 58 infants had blood samples taken at about the same time as maternal blood samples. Only 18 of the infants had blood levels of levetiracetam above the lower limit of quantification (1.8 mg/L). The authors estimated the average infant levetiracetam serum concentration to be 0.9 mg/L (range 0.9 to 4.5 mg/L), assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 5.3% (range 2.1 to 20.4%) of their mothers’ blood levels.[11]

Fifty-four infants whose mothers were taking levetiracetam during pregnancy and postpartum had measurements of levetiracetam in serum taken on day 2 to 4 postpartum for routine monitoring. The infant serum concentration ranged from 0.5 to 2.3 mg/L, which averaged 19% of the maternal serum concentration. Another 10 infants had serum levetiracetam levels taken between day 7 and 31 (median 12 days) postpartum. Their serum levels ranged from 0.5 to 5.1 mg/L. Infant serum levels averaged 14% of simultaneous maternal serum levels.[7]

### Effects in Breastfed Infants

A woman with epilepsy took phenytoin and valproic acid during pregnancy. She began breastfeeding on day 3 postpartum and had a seizure on day 7 postpartum. Levetiracetam (dosage not reported) was started and the infant became increasingly hypotonic and nursed poorly. Breastfeeding was discontinued and the infant was discharged from the hospital in a healthy condition.[2]

Seven exclusively breastfed infants whose mothers were taking an average dosage of 2430 mg daily (range 1500 to 3500 mg daily) of levetiracetam plus various other anticonvulsants during pregnancy and lactation appeared healthy to the investigators throughout the 6 to 8 week study period. An eighth partially breastfed infant whose mother was taking valproate and oxcarbazepine started taking levetiracetam 9 months postpartum appeared healthy at 10 months of age.[4]

No adverse effects were reported in 10 newborns who were 4 to 23 days old who were breastfed during maternal intake of levetiracetam 1000 to 3000 mg daily. Four mothers were also taking lamotrigine; 1 was taking carbamazepine; and one was taking tiagabine, clobazam and oxcarbazepine.[5]

A woman with long-standing seizure disorder was taking primidone and levetiracetam became pregnant. The dosage of her medications were reduced during pregnancy to provide a levetiracetam serum concentration of 40.5 mg/L and a primidone (phenobarbital) serum concentration of 3.4 mg/L. The mother was instructed to discontinue breastfeeding after 3 days. The following day her infant developed withdrawal seizures. After reinstituting breastfeeding, the infant's seizures stopped and did not recur. The infant had no abnormal findings and was thriving and seizure free at 6 months of age.[12]

The infants (including 3 preterm) of 18 nursing mothers who were taking levetiracetam and called the Pharmacovigilance Center in Lyon, France before breastfeeding were paired with 18 control infants. The median dosage was 1000 mg daily (range 500 to 3000 mg daily) and 8 were receiving at least one additional anticonvulsant. The median duration of breastfeeding was 40 days (range 10 to 224 days), and 13 newborns were exclusively breastfed. Breastfed infants were followed for a median of 9.1 months (range 0.75 to 73 months). One 25-day-old infant whose mother was taking levetiracetam 3000 mg daily plus clobazam was hospitalized for sedation, vomiting, and weight loss, and improved rapidly after breastfeeding discontinuation. Another infant exposed to levetiracetam and clobazam had poor weight gain, but it appeared to be caused by poor milk production. Other than these infants, all levetiracetam and control infants grew and developed normally.[10]

A mother with epilepsy took levetiracetam 2000 mg daily plus lacosamide 200 mg twice daily while breastfeeding their infants. She breastfed (extent not stated) her infant for 7 months with no infant adverse effects at 24 months of age.[13]

A pregnant woman suffered blood clots in the sinuses and 2 small intracranial hemorrhages followed by status epilepticus at 8 weeks of gestation. She was treated with levetiracetam 1000 mg and lacosamide 100 mg twice daily as well as enoxaparin and labetalol for the rest of her pregnancy and postpartum. Her infant was delivered at 36 weeks gestation and about 50% breastfed for the first days of life. The infant was sleepy and fed poorly, but pauses in breastfeeding did not improve the infant's condition. Breastfeeding was discontinued at 15 days postpartum and the infant gradually improved. The infant showed normal development at 7 months of age.[6] Lacosamide and levetiracetam were probably the cause of the infant's sedation and poor feeding.

In a study of 20 mothers taking levetiracetam and their 21 infants, 3 women taking levetiracetam monotherapy in daily doses of 3750, 3000 and 1500 mg reported drowsiness in their fully breastfed infants. Drowsiness resolved shortly after switching to partial breastfeeding. No adverse effects were reported by 14 other mothers who were on levetiracetam monotherapy, and 3 mothers who were on polytherapy with sodium valproate, lacosamide, or topiramate. All the infants (n = 21) of the mothers participating in the study had age-appropriate weight gain.[9]

In a multicenter study of women in the United Kingdom exposed to anticonvulsants during pregnancy and breastfeeding, 84 women who were exposed to anticonvulsants breastfed their infants were compared to 81 women not exposed to antiseizure medications. Of the women taking anticonvulsants 22% were taking levetiracetam alone. No negative effect of breastfeeding was observed in cognitive, language or motor development in the breastfed infants at 1 and 2 years, although only 29% of women breastfed longer than 3 months.[14]

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 9 unspecified serious adverse reactions reported in breastfed infants associated with levetiracetam. Further details of the cases were not reported.[15]

### Effects on Lactation and Breastmilk

In a study of mothers taking levetiracetam during breastfeeding, 7 of 18 mothers discontinued or reduced breastfeeding because of poor milk output. The infant of one mother taking 3000 mg of levetiracetam daily plus clobazam had poor weight gain at day 15 of life.[10]

A retrospective study of 102 women with epilepsy found that women taking levetiracetam were more likely to initiate and continue breastfeeding at 3 months postpartum than women taking lamotrigine.[16]

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 López-Fraile IP, Cid AO, Juste AO, et al. Levetiracetam plasma level monitoring during pregnancy, delivery, and postpartum: clinical and outcome implications. Epilepsy Behav 2009;15:372–5.19362602
2 Kramer G, Hosli I, Glanzmann R, et al. Levetiracetam accumulation in human breast milk. Epilepsia 2002;43 (Suppl 7):105. doi:10.1046/j.1528-1157.43.s7.1.x 11879395
3 Greenhill L, Betts T, Yarrow H, et al. Breast milk levels of levetiracetam after delivery. Epilepsia 2004;45 (Suppl. 7):230. doi:10.1111/j.0013-9580.2004.t01-21-00001.x 15009224
4 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775–7.15857447
5 Tomson T, Palm R, Kallen K, et al. Pharmacokinetics of levetiracetam during pregnancy, delivery, in the neonatal period, and lactation. Epilepsia 2007;48:1111–6.17381438
6 Ylikotila P, Ketola RA, Timonen S, et al. Early pregnancy cerebral venous thrombosis and status epilepticus treated with levetiracetam and lacosamide throughout pregnancy. Reprod Toxicol 2015;57:204–6.26187779
7 Kacirova I, Grundmann M, Brozmanova H. Umbilical cord, maternal milk, and breastfed infant levetiracetam concentrations monitoring at delivery and during early postpartum period. Pharmaceutics 2021;13:398.33802733
8 Suryavanshi SV, Wang S, Hajducek DM, et al. Coupling pre- and postnatal infant exposures with physiologically based pharmacokinetic modeling to predict cumulative maternal levetiracetam exposure during breastfeeding. Clin Pharmacokinet 2024;63:1735–48.39586935
9 Dinavitser N, Kohn E, Berlin M, et al. Levetiracetam in lactation: How much is excreted into the human breast milk? Br J Clin Pharmacol 2022;88:199–205.34131926
10 Paret N, Gouraud A, Bernard N, et al. Long-term follow-up of infants exposed to levetiracetam during breastfeeding: Comparison to a control group. Birth Defects Res A Clin Mol Teratol 2014;100:537–8. doi:10.1002/bdra.23258
11 Birnbaum AK, Meador KJ, Karanam A, et al. Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441–50.31886825
12 Rauchenzauner M, Kiechl-Kohlendorfer U, Rostasy K, et al. Old and new antiepileptic drugs during pregnancy and lactation - report of a case. Epilepsy Behav 2011;20:719–20.21444249
13 Lattanzi S, Cagnetti C, Foschi N, et al. Lacosamide during pregnancy and breastfeeding. Neurol Neurochir Pol 2017;51:266–9.28385340
14 Bromley RL, Bullen P, Campbell E, et al. Neurodevelopment of babies born to mothers with epilepsy: A prospective observational cohort study. Epilepsia 2023;64:2454–71.37403560
15 Heerfordt IM, Gotfredsen DR, Horwitz H, et al. EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021
16 Al-Faraj AO, Pandey S, Herlihy MM, et al. Factors affecting breastfeeding in women with epilepsy. Epilepsia 2021;62:2171–9.34289107

## Substance Identification

### Substance Name

Levetiracetam

### CAS Registry Number

102767-28-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants